# Avelumab

CASRN: 1537032-82-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of avelumab during breastfeeding. Because avelumab is a large protein molecule with a molecular weight of about 147,000 Da, the amount in milk is likely to be very low and absorption is unlikely because it is probably destroyed in the infant's gastrointestinal tract. Until more data become available, avelumab should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant. The manufacturer recommends that mothers not breastfeed during treatment and for at least one month after the last dose of avelumab.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Avelumab

### CAS Registry Number

1537032-82-8

### Drug Class

Breast Feeding

Lactation

Antineoplastic Agents

Biological Response Modifiers

Immunologic Adjuvants

Immune Checkpoint Inhibitors

Antibodies, Monoclonal